# Ceftaroline

CASRN: 402741-13-3

## Drug Levels and Effects

### Summary of Use during Lactation

Although no information is available on the use of ceftaroline during breastfeeding, cephalosporins are generally not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Ceftaroline is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Ceftaroline

### CAS Registry Number

402741-13-3

### Drug Class

Breast Feeding

Lactation

Anti-Bacterial Agents

Anti-Infective Agents

Cephalosporins